# Articaine

CASRN: 23964-58-1

## Drug Levels and Effects

### Summary of Use during Lactation

Based on the low excretion of articaine into breastmilk, a single dose of articaine injected during breastfeeding is unlikely to adversely affect the breastfed infant.

### Drug Levels

Maternal Levels. Two mothers donated 3 mL of breastmilk before 68 mg of articaine injection for dental anesthesia and at 15 and 30 minutes, 1, 1.5, 2 and 3 hours after administration. Peak milk articaine concentrations of 237 and 270 mcg/L occurred 15 minutes after administration and fell to about 10 mcg/L by 3 hours after the dose.[1]

Six nursing mothers were given an intraoral injection of 1.7 mL of a 4% articaine injection with 1:100,000 epinephrine that provided a total dose of 68 mg articaine. Three mL milk samples were collected before articaine administration and at 0.25, 0.5, 1, 1.5, 2, and 3 hours after the injection. Peak milk articaine levels, which occurred at 15 minutes after injection, averaged 257 mcg/L. Another 6 mothers received the same dose, but emptied their breasts before the dose and 3 hours after the dose. The concentration of articaine in the 3 hour sample was 15.6 mcg/L. Using these data, a computer model was constructed and predicted that the articaine dose in a breastfed infant would be 1.12 mg of articaine, which is equivalent to 0.05% of the safe dose of 5 mg/kg. The predicted peak concentration in infant plasma was 0.19 mcg/L compared to a toxic concentration of 3,100 mcg/L.[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Liu S, Wu X, Liu D, . Development and application of a quantitative LC-MS/MS assay for the analysis of four dental local anesthetics in human plasma and breast milk. J Chromatogr B Analyt Technol Biomed Life Sci 2025;1250:124384.
2 Liu SP, Wu XF, Li XQ, . Assessing whether breastfeeding is safe after an intraoral injection of 68 mg of articaine. J Am Dent Assoc 2025;156:477–87.e6.40467122

## Substance Identification

### Substance Name

Articaine

### CAS Registry Number

23964-58-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anesthetics, Local